# Auranofin

CASRN: 34031-32-8

## Drug Levels and Effects

### Summary of Use during Lactation

Excretion of gold into milk after auranofin has not been studied. Case reports with other gold salts indicate that gold appears in milk in small quantities and at least a little of it is absorbed because it is detectable in the infant's urine. No convincing cases of toxicity have been reported. Opinions of authors of review articles vary from recommending avoidance to allowing use.[1-5] Monitoring for possible adverse effects in the breastfed infant would seem prudent.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Four infants reportedly have been breastfed during maternal gold therapy (including gold sodium thiomalate and gold aurothioglucose).[6-9] Transient facial edema occurred in an 18-month-old infant, 3 months after the mother's treatment stopped.[6] The reaction was possibly due to gold in the mother's milk ingested by the infant.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Rheumatoid Arthritis) Etanercept, Gold Sodium Thiomalate, Hydroxychloroquine, Infliximab, Methotrexate, Penicillamine, Sulfasalazine

### References

1 Østensen M. Treatment with immunosuppressive and disease modifying drugs during pregnancy and lactation. Am J Reprod Immunol 1992;28:148-52 1285866
2 Rayburn WF. Connective tissue disorders and pregnancy. Recommendations for prescribing. J Reprod Med 1998;43:341-9 9583066
3 Janssen NM, Genta MS. The effects of immunosuppressive and anti-inflammatory medications on fertility, pregnancy and lactation. Arch Intern Med 2000;160:610-9 10724046
4 Ramsey-Goldman R, Schilling E. Optimum use of disease-modifying and immunosuppressive antirheumatic agents during pregnancy and lactation. Clin Immunother 1996;5:40-58.doi:10.1007/BF03259314
5 Brooks PM, Needs CJ. Antirheumatic drugs in pregnancy and lactation. Baillieres Clin Rheumatol 1990;4:157-71 2282661
6 Bell RA, Dale IM. Gold secretion in maternal milk. Arthritis Rheum 1976;19:1374 826260
7 Sørensen SS. Pharmacodynamic examination of patients treated with gold preparations. Nord Med 1970;84:1508 5494985
8 Blau SP. Metabolism of gold during lactation. Arthritis Rheum 1973;16:777-8 4757877
9 Bennett PN, Humphries SJ, Osborne JP, et al. Use of sodium aurothiomalate during lactation. Br J Clin Pharmacol 1990;29:777-9 2116162

## Substance Identification

### Substance Name

Auranofin

### CAS Registry Number

34031-32-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antirheumatic Agents